# d-Xylose C14

## Drug Levels and Effects

### Summary of Use during Lactation

Information in this record refers to the use of d-xylose C 14 as a diagnostic agent. Breastfeeding does not need to be suspended after administration of d-xylose C 14.[1,2]

### Drug Levels

Carbon 14 is a low-energy beta emitter with a physical half-life of about 5730 years.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### References

1 Leide-Svegborn S, Ahlgren L, Johansson L, et al. Excretion of radionuclides in human breast milk after nuclear medicine examinations. Biokinetic and dosimetric data and recommendations on breastfeeding interruption. Eur J Nucl Med Mol Imaging 2016;43:808-21.26732471
2 Mattsson S, Johansson L, Leide Svegborn S, et al. Radiation dose to patients from radiopharmaceuticals: A compendium of current information related to frequently used substances. Annex D. Recommendations on breast-feeding interruptions. Ann ICRP 2015;44 (2 Suppl):319-21.

## Substance Identification

### Substance Name

d-Xylose C14

### Drug Class

Breast Feeding

Lactation

Milk, Human

Radiopharmaceuticals

Carbon Radioisotopes

Diagnostic Agents